# Certolizumab Pegol

CASRN: 428863-50-7

## Drug Levels and Effects

### Summary of Use during Lactation

Certolizumab is excreted into breastmilk in some, but not all, women in small amounts. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] Polyethylene glycol is not excreted into breastmilk.[2] Numerous experts and professional guidelines have stated that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[3-11] Anti-TNF agents appear to reduce the levels of tumor necrosis factor and IP-10 in the milk of mothers with inflammatory bowel disease in the early postpartum period.[12] This reduction in TNF might lead to decreased milk production, so extra lactation support might be necessary in women taking certolizumab pegol.

### Drug Levels

Maternal Levels. One woman received certolizumab pegol 400 mg by subcutaneous injection every 4 weeks during pregnancy and postpartum. The last dose during pregnancy was 1 week prior to delivery. Breastmilk samples were collected 1 and 2 weeks postpartum and 4 hours, 3 days and 6 days after the first postpartum dose which was given at 3 weeks postpartum. Certolizumab was undetectable (<410 mcg/L) in all 5 samples.[13]

Two women were receiving certolizumab pegol 200 mg every two weeks. Certolizumab was undetectable (<0.6 mg/L) in breastmilk one hour after the dose in both women and 4 hours after the dose in one of them.[14]

Seventeen nursing mothers who were taking certolizumab pegol for an inflammatory condition and were at least 6 weeks postpartum had certolizumab measured in their breastmilk at least 8 times over a dosage interval. The maternal dose was 200 mg every 2 weeks in 16 women and 400 mg every 4 weeks in another. Out of 137 breastmilk samples, 77 had no detectable certolizumab and 4 mothers had no detectable (<32 mcg/L) certolizumab in milk at any time point, including the mother who received the 400 mg dose. Of the 13 other mothers, the highest concentrations found were 76 mcg/L, which was found in one woman at 6 and 8 days after the dose, and 65 and 66 mcg/L in another at 4 and 6 days after the dose, respectively. All other mothers with detectable certolizumab had milk levels that were less than 64 mcg/L. The median time of peak milk levels was 5.05 days (range 2.9 to 11.9 days). The estimated average daily infant dose ranged from 0 to 0.0104 mg/kg daily. No measurable levels of total polyethylene glycol were detected in 134 of 137 breast milk samples; 3 samples had indeterminate results upon retesting.[2]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 13 women receiving certolizumab pegol provided milk samples at 1, 12, 24, and 48 hours after drug administration. Some also provided samples at 72, 96, 120, and 168 hours after drug administration. Three of the women had detectable (>0.01 mg/L) certolizumab levels in milk. Peak concentrations in breastmilk ranged from 0.27 to 0.29 mg/L and occurred at 12 to 48 hours after the dose.[15]

A woman in Japan with rheumatoid arthritis was treat with certolizumab pegol (dosage not stated) beginning at 28 weeks of pregnancy and continuing postpartum. Breastmilk samples taken before delivery, at delivery, and 4 and 8 weeks postpartum all contained unmeasurable (<0.1 mg/L) amounts of certolizumab.[16]

Infant Levels. One woman received certolizumab pegol 400 mg by subcutaneous injection every 4 weeks during pregnancy and postpartum. The last dose during pregnancy was 1 week prior to delivery. At birth, her infant had a serum concentration of 1.02 mg/L. At one month of age, her breastfed (extent not stated) infant had a serum concentration of 0.84 mg/L seven days after the previous injection.[13,16]

In a study reported in the product information, plasma certolizumab concentrations were collected 4 weeks after birth in 9 breastfed infants whose mothers had been currently taking certolizumab pegol (regardless of being exclusively breastfed or not). Certolizumab was not measurable (<32 mcg/L) in infant plasma.

### Effects in Breastfed Infants

Eight women who received certolizumab pegol during pregnancy and postpartum breastfed (extent not stated) their infants. No mention was made of side effects in the infants.[13]

Seventeen mothers received certolizumab pegol for an inflammatory condition and breastfed their infants. During a study period starting at least 6 weeks postpartum and after at least 3 doses of certolizumab pegol, 8 of the infants experienced 11 adverse effects. None of the infants had any unusual or serious adverse reactions attributed to the drug and all effects were consistent with events typically experienced by infants of the same age, such as upper respiratory infection, Candida infection, or vomiting.[16]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 54 women received certolizumab pegol while breastfeeding their infants. Among those who received certolizumab or another biologic agent while breastfeeding, infant growth, development or infection rate was no different from infants whose mothers received no treatment. An additional 67 women received a biologic agent plus a thiopurine. Infant outcomes were similar in this group.[15]

Six women being treated with certolizumab pegol for uveitis during pregnancy and postpartum breastfed their infants (extent not sated). One of the mothers also took hydroxychloroquine. In 6 months of follow-up, no infants had any infections, and all had inactivated vaccines specified in the Spanish national immunization program (hepatitis B, diphtheria, tetanus and acellular pertussis [DTaP], inactivated poliovirus, Haemophilus influenzae type B conjugate, pneumococcal conjugate and meningococcal C conjugate). One of the infants also received rotavirus vaccine. No complications were seen with any of the vaccines.[17]

Three women were treated with certolizumab, two during pregnancy and breastfeeding and one during breastfeeding alone. Infant follow-up at 6, 18 and 32 months, respectively, found no adverse reactions and normal growth and neurodevelopment in the infants.[18]

A national prospective registry of patients with rheumatic diseases who were treated with biological DMARDs was conducted in Spain. One whose mother was taking certolizumab was breastfed (extent not stated) with no mild or severe adverse events reported in the infant.[19]

A retrospective study of mothers in Spain taking certolizumab pegol for psoriasis found 11 women who breastfed (extent not stated) their infants during therapy. No adverse events were reported in breastfed infants.[20]

An analysis of the US Food and Drug Administration’s FAERS database of 7,022 spontaneous adverse reaction reports of anti-TNF drugs found that they may cause an increased risk of lactation insufficiency and disorders. Drugs that were studied included adalimumab, infliximab, golimumab, certolizumab, and etanercept. The authors noted that TNF alpha is involved in milk production, adding biological plausibility to the findings.[21]

A retrospective, single-center study of patients treated with certolizumab pegol during lactation found four infants who were exposed. No infant experienced serious infections, vaccine-related complications, or developmental delay during follow-up (mean 39.3 months). Vaccinations were administered according to the Turkish National Immunization Schedule appropriate for the infants' ages during follow-up.[22]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Inflammatory Bowel Disease) Adalimumab, Infliximab; (Rheumatoid Arthritis) Adalimumab, Etanercept, Infliximab, Tocilizumab

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
2 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890–6.28814432
3 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508–24.30658060
4 Smith CH, Yiu ZZN, Bale T, et al. British Association of Dermatologists guidelines for biologic therapy for psoriasis 2020: A rapid update. Br J Dermatol 2020;183:628–37.32189327
5 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
6 Yeung J, Gooderham MJ, Grewal P, et al. Management of plaque psoriasis with biologic therapies in women of child-bearing potential consensus paper. J Cutan Med Surg 2020;24 (1_Suppl):3S–14S.32500730
7 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
8 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
9 Thatiparthi A, Martin A, Liu J, et al. Biologic treatment algorithms for moderate-to-severe psoriasis with comorbid conditions and special populations: A review. Am J Clin Dermatol 2021;22:425–42.33861409
10 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
11 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901
12 Sepiashvili L, Brydon A, Koroshegyi C, et al. Reduction of tumor necrosis factor (TNF) in milk of women receiving anti-TNF antibody. Pediatr Res 2025;97:1935–42.39487320
13 Mahadevan U, Wolf DC, Dubinsky M, et al. Placental transfer of anti-tumor necrosis factor agents in pregnant patients with inflammatory bowel disease. Clin Gastroenterol Hepatol 2013;11:286–92.23200982
14 Förger F, Zbinden A, Villiger PM. Certolizumab treatment during late pregnancy in patients with rheumatic diseases: Low drug levels in cord blood but possible risk for maternal infections. A case series of 13 patients. Joint Bone Spine 2016;83:341–3.26617214
15 Matro R, Martin CF, Wolf D, et al. Exposure concentrations of infants breastfed by women receiving biologic therapies for inflammatory bowel diseases and effects of breastfeeding on infections and development. Gastroenterology 2018;155:696–704.29857090
16 Mahadevan-Velayos U, Siegel C, Abreu MT. Certolizumab use in pregnancy: Low levels detected in cord blood. Presented at the 22nd Annual Organization of Teratogen Information Services Education Conference June 27 - July 1, 2009
17 Prieto-Peña D, Calderón-Goercke M, Adán A, et al. Efficacy and safety of certolizumab pegol in pregnant women with uveitis. Recommendations on the management with immunosuppressive and biologic therapies in uveitis during pregnancy. Clin Exp Rheumatol 2021;39:105–14.33124565
18 Lambiase S, Pensa C, Shumak RG, et al. Certolizumab pegol in pregnant and breastfeeding psoriatic patients. Ital J Dermatol Venerol 2022;157:383–34.35274878
19 Membrive-Jiménez C, Sánchez-Piedra C, Martínez-González O, et al. Safety and effectiveness of bDMARDs during pregnancy in patients with rheumatic diseases: Real-world data from the BIOBADASER registry. Reumatol Clin (Engl Ed) 2023;19:500–6.37945183
20 Sahuquillo-Torralba A, Mansilla-Polo M, Pujol-Marco C, et al. Certolizumab pegol effectiveness, survival and safety in patients with psoriasis: A multicenter retrospective analysis in daily clinical practice by the Spanish Psoriasis Group. Int J Dermatol 2024;63:1720–7.38736107
21 Yan Z, Chen H, Sun J, et al. Divergent safety profiles of TNF inhibitors in pregnancy: A comprehensive pharmacovigilance analysis of the FAERS database. J Autoimmun 2026;160:103553.41932089
22 Acar B, Aktas B, Ayla AY, et al. Pregnancy and lactation outcomes of women with rheumatic diseases treated with certolizumab pegol: Real-world experience from a tertiary center. Int J Rheum Dis 2026;29:e70741.42286887

## Substance Identification

### Substance Name

Certolizumab Pegol

### CAS Registry Number

428863-50-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Immunoglobulin Fab Fragments

Antirheumatic Agents

Gastrointestinal Agents

Tumor Necrosis Factor Inhibitors